# Mycophenolate

CASRN: 24280-93-1

## Drug Levels and Effects

### Summary of Use during Lactation

Information from 3 patients on the excretion of mycophenolate into milk is inconsistent. A few infants have reportedly been breastfed during mycophenolate therapy, with no adverse effects reported. Because little information is available on the use of mycophenolate during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. A woman was treated for lupus nephritis with delayed-release mycophenolate (Myfortic) in a dose of 720 mg in the morning and evening and 360 mg midday for a total of 21.6 mg/kg daily. Steady-state milk samples before and at 2 and 4 hours after a morning dose of 720 mg contained 35 mg/L, 80 mg/L, and 28 mg/L, respectively.[1,2] An exact relative infant dosage cannot be calculated from these data points, but the value lies between 19% and 56% (probably closer to 19%) of the mother’s weight-adjusted dosage using the standard milk intake of 150 mL/kg daily.

One woman with lupus nephritis was receiving mycophenolate mofetil 500 mg twice daily, which was increased to 1000 mg twice daily. A second woman with a kidney transplant was receiving enteric-coated mycophenolate sodium 720 mg twice daily. Milk samples were obtained at 0, 1, 2, 4, 6, 8, 10, and 12 hours from the women. In the first woman, the average milk concentrations were 16.3 and 38.7 mcg/L at the 500 mg and 1000 mg dosages, respectively. These translated into a relative infant dosage of 0.02% at both dosages. In the second woman, the drug was undetectable (<60 ng/L) in milk at any time. Interactions with concurrent medications sevelamer and pantoprazole could have decreased the serum and hence milk levels, but patient nonadherence and other factors could have played a role.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

The National Transplantation Pregnancy Registry (renamed Transplant Pregnancy Registry International) collected information on 6 mothers (5 kidney and 2 heart transplants) who breastfed 7 infants while taking a mycophenolate product. The maximum time that any of the infants was breastfed was 14 months. None of the infants had any reported adverse reactions.[4] Another case series from the Transplant Pregnancy Registry International reported women who received heart transplants reported that 3 women breastfed their infants while taking mycophenolate. Durations of breastfeeding and infant outcomes were not reported.[5] It is possible that some of these women were the same as those in the case series above.

In case series of 77 patients from the UK who received either a liver or cardiothoracic transplant, 9 took mycophenolate mofetil throughout pregnancy. Overall, 60% breastfed their infants, although the exact number who breastfed with mycophenolate or their outcomes were not reported.[6]

An Australian case series reported 3 women with heart transplants who had a total of 5 infants, all of whom were breastfed (extent not stated). Two of the women took mycophenolate mofetil postpartum, one in a dosage of 720 mg twice daily and the other woman in a dosage of 1 gram twice daily. No adverse infant effects were reported up to the times of hospital discharge.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Azathioprine, Cyclosporine, Tacrolimus

### References

1 Huerta A, Caballero Bermejo AF, de Villa LF, et al. Measurement of the passage of mycophenolic acid into breast milk in a patient with lupus nephritis. Kidney Int 2021;100:711.
2 Ruiz‐Antorán B. Personal communication. August 26 & 30, 2021.
3 Krutsch K, Burkham J, Datta P, Hale TW. Transfer of mycophenolic acid into human milk. J Nephrol 2023;36:1715-7.37285005
4 Constantinescu S, Pai A, Coscia LA, et al. Breast-feeding after transplantation. Best Pract Res Clin Obstet Gynaecol 2014;28:1163-73.25271063
5 Punnoose LR, Coscia LA, Armenti DP, et al. Pregnancy outcomes in heart transplant recipients. J Heart Lung Transplant 2020;39:473-80.32201090
6 Mohamed-Ahmed O, Nelson-Piercy C, Bramham K, et al. Pregnancy outcomes in liver and cardiothoracic transplant recipients: A UK national cohort study. PLoS One 2014;9:e89151.24586554
7 Boyle S, Sung-Him Mew T, Lust K, et al. Pregnancy following heart transplantation: A single centre case series and review of the literature. Heart Lung Circ 2021;30:144-53.33162367

## Substance Identification

### Substance Name

Mycophenolate

### CAS Registry Number

128794-94-5; 24280-93-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunosuppressive Agents